# Satralizumab

CASRN: 1535963-91-7

## Drug Levels and Effects

### Summary of Use during Lactation

Case reports indicate that satralizumab is not detectable in milk and that breastfed infants are not adversely affected. Until more data become available, satralizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1]

### Drug Levels

Maternal Levels. A woman with neuromyelitis optica spectrum disorder received satralizumab 120 mg subcutaneously pregnancy and continued every 4 weeks during lactation. Two milk samples obtained at 19 and 26 days after 2 different doses contained undetectable (<0.2 mg/L) levels of satralizumab.[2]

A woman with neuromyelitis optica spectrum disorder received satralizumab 120 mg subcutaneously every 4 weeks during lactation. Satralizumab levels in breast milk on postpartum day 2 were not measurable (<0.2 mg/L). After breastmilk was collected to measure the concentration, 120 mg of satralizumab was injected on postpartum day 2. The day after satralizumab injection, the maternal serum concentration increased to 24.1 mg/L, but the concentration in breast milk was still not measurable.[3]

A woman with neuromyelitis optica spectrum disorder received satralizumab during pregnancy and postpartum in a dose of 120 mg every 4 weeks subcutaneously. Milk samples taken at 3 days postpartum (2 days after the previous dose) and at 50 days postpartum (21 days after the previous dose) both had concentrations in milk of less than 0.2 mg/L.[4]

Infant Levels. A woman with neuromyelitis optica spectrum disorder received satralizumab 120 mg subcutaneously pregnancy and continued every 4 weeks during breastfeeding. Two infant serum samples obtained at 19 and 26 days after 2 different doses contained undetectable (<0.2 mg/L) levels of satralizumab.[2]

### Effects in Breastfed Infants

A woman with neuromyelitis optica spectrum disorder received satralizumab 120 mg subcutaneously pregnancy and continued every 4 weeks while breastfeeding. She was also receiving azathioprine 75 mg daily and oral prednisolone beginning at 20 mg daily and tapering to 8 mg daily. She breastfed her infant for 10 months. The infant remained healthy, with no serious infection and normal growth and development.[2]

A woman with neuromyelitis optica spectrum disorder became pregnant via in vitro fertilization. Postpartum she was taking prednisolone 10 mg daily and satralizumab 120 mg every 4 weeks. Her infant was successfully breastfed (extent not stated) and had no growth or developmental problems as of 10 months old.[3]

A woman with neuromyelitis optica spectrum disorder received satralizumab 120 mg subcutaneously every 4 weeks as well as prednisolone 7 mg daily during lactation. She breastfed her infant for 3 months (extent not stated). On postpartum day 60, the mother developed a transient fever secondary to SARS-CoV-2 infection. The infant also developed fever and tested positive on an antigen test, without respiratory distress. Both recovered without treatment. The infant did not receive live attenuated vaccines during the first 6 months after birth but received all scheduled inactivated vaccines. The infant continued routine follow-up with a pediatrician and no abnormalities were observed.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
2 Yoshida T, Watanabe O, Nomura M, . Neuromyelitis optica spectrum disorder safely and successfully treated with satralizumab during pregnancy and breastfeeding: A case report. Front Neurol 2023;14:1322412.38162440
3 Yaguchi H, Miyagawa S, Nakada R, . Safe childbirth in a patient with neuromyelitis optica spectrum disorder treated with satralizumab. Intern Med 2026;65:887-90.40803858
4 Hasegawa T, Ando T, Sekikawa H, . Intitiation of satralizumab during pregnancy for successful childbirth in neuromyelitis optica spectrum disorder: A case report and literature review. J Neuroimmunol 2026;419:578997.42247768

## Substance Identification

### Substance Name

Satralizumab

### CAS Registry Number

1535963-91-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized